# Nitrous Oxide

CASRN: 10024-97-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because the serum half-life of nitrous oxide in the mother is short and the drug is not expected to be absorbed by the infant, no waiting period or discarding of milk is required.[1,2] Some evidence indicates that primiparous mothers who use inhaled nitrous oxide during labor for analgesia have better breastfeeding success than mothers who do not. If used as part of general anesthesia, breastfeeding can be resumed as soon as the mother has recovered sufficiently from anesthesia to nurse. When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure.

### Drug Levels

The serum half-life of nitrous oxide is less than 3 minutes, so extensive passage into milk is unlikely.[1]

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A randomized, but nonblinded, study in women undergoing cesarean section compared epidural anesthesia with bupivacaine to general anesthesia with intravenous thiopental 4 mg/kg and succinylcholine 1.5 mg/kg for induction followed by nitrous oxide and isoflurane. The time to the first breastfeed was significantly shorter (107 vs 228 minutes) with the epidural anesthesia than with general anesthesia. This difference was probably caused by the anesthesia's effects on the infant, because the Apgar and neurologic and adaptive scores were significantly lower in the general anesthesia group of infants. It is not known what part nitrous oxide played in this difference in outcome.[3]

A retrospective database study found that primiparous women who receive a nitrous oxide-oxygen mixture for pain during delivery in addition to routine analgesia were more likely to be breastfeeding their infants at 48 hours postpartum than women who did not receive nitrous oxide. This correlation was not found when all women were included in the analysis.[4]

In a nonrandomized, nonblinded retrospective study, 62 women who chose labor with gas analgesia with 50% nitrous oxide and oxygen were compared to a control group of 124 women who did not receive gas analgesia during labor. Most of the women in the study were primiparous. Use of other labor medications was not reported. Women who received nitrous oxide had higher rates of breastfeeding and exclusive breastfeeding than those who did not at 7 days after discharge, at 1 month postpartum, and at 3 months postpartum.[5]

A randomized study compared intravenous meperidine 50 mg to inhaled nitrous oxide for labor analgesia. A higher percentage of mothers receiving nitrous oxide were able to breastfeed immediately after birth (95% vs 88%), but the difference was not statistically significant. There were no differences in breastfeeding rates at 24 hours after delivery or formula use.[6]

### References

1 Hale TW. (1999). Anesthetic medications in breastfeeding mothers. J Hum Lact.
2 Rooks JP. (2011). Safety and risks of nitrous oxide labor analgesia: A review. J Midwifery Womens Health.
3 Sener EB, Guldogus N, Karakaya D, et al. (2003). Comparison of neonatal effects of epidural and general anesthesia for cesarean section. Gynecol Obstet Invest.
4 Jordan S, Emery S, Watkins A, et al. (2009). Associations of drugs routinely given in labour with breastfeeding at 48 hours: Analysis of the Cardiff births survey. BJOG.
5 Zanardo V, Volpe F, Parotto M, et al. (2018). Nitrous oxide labor analgesia and pain relief memory in breastfeeding women. J Matern Fetal Neonatal Med.
6 Zuarez-Easton S, Zafran N, Garmi G, et al. (2023). Meperidine compared with nitrous oxide for intrapartum pain relief in multiparous patients: A randomized controlled trial. Obstet Gynecol.

## Substance Identification

### Substance Name

Nitrous Oxide

### CAS Registry Number

10024-97-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Inhalation